# Baclofen

CASRN: 1134-47-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that orally administered baclofen appears in low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Monitor newborn infants for signs of sedation. Low intrathecal doses and topical application produce even lower milk levels and are unlikely to affect the nursing infant.

### Drug Levels

Maternal Levels. A woman with spastic paraplegia was given a single oral 20 mg dose of baclofen 14 days postpartum. A peak milk level of about 0.13 mg/L occurred 4 hours after the dose. The half-life in milk was 5.6 hours. The authors estimated that the total amount recovered in breastmilk over 26 hours was 22 mcg.[1]

A woman with spinal cord injury was taking baclofen 20 mg four times at evenly spaced intervals between 0600 and 2200 daily during pregnancy and postpartum. Breast milk samples were collected at estimated trough (0530) and peak (2400) times on 3 consecutive days postpartum. Trough levels averaged 0.297 mg/L (range 0.28 to 0.32 mg/L). Peak levels averaged 0.343 mg/L (range 0.32 to 0.38 mg/L).[2] Using the average of the peaks and troughs, a fully breastfed infant would receive a daily dosage of 0.048 mg/kg, which would be 3.6% of the maternal weight adjusted dosage.

A woman with long-standing spasticity and flexion myopathy from a head injury was given continuous baclofen infusion via intrathecal pump during pregnancy and postpartum at a dose of 330 mcg daily. One postpartum sample of breastmilk was analyzed and found to contain 0.617 mcg/L of baclofen.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An infant was born after exposure to baclofen in utero. The mother was taking baclofen 10 mg twice daily plus clonazepam 1 mg orally twice daily and sustained-release oxycodone 50 mg daily in divided doses. The infant was breast fed and bottle fed while the mother continued taking baclofen. Neonatal withdrawal symptoms necessitated phenobarbital administration. The infant also received baclofen 0.5 mg/kg daily in 4 divided doses that was weaned and decreased by day 9 of life. Neurologic examination was normal at discharge on day 16 and at 6-weeks of age.[4]

A woman with spinal cord injury was taking baclofen 20 mg four daily during pregnancy and postpartum. After birth, the infant received an initial baclofen dosage of 0.1 mg/kg daily for 4 days, plus about 1/3 of the diet as breastmilk containing baclofen (about 0.016 mg/kg daily), followed by a daily decrease of 0.01 mg/kg daily until discontinuation of the baclofen on the 13th day of life. Breastmilk intake was eventually increased to 50% of the infant's diet. Daily assessment for neonatal abstinence syndrome (NAS) was performed using the modified Finnegan NAS scoring system. Of 82 modified Finnegan NAS scores obtained in the first 16 days of life, the mean score was 2. The maximum NAS score of 9 was observed on the 13th day of life. At no point were there three consecutive NAS scores of 8 or greater, indicating no need for further pharmacological intervention. The infant was discharged 3 days after the taper ended.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Eriksson G, Swahn CG. Concentration of baclofen in serum and breast milk from a lactating woman. Scand J Clin Lab Investig 1981;41:185-7.7313501
2 Lin HH, Barton N, Wiegand TJ. Baclofen distribution into breast milk-a potential for toxicity? J Med Toxicol 2014;10:86. doi:10.1007/s13181-013-0376-x
3 Hara T, Nakajima M, Sugano H, et al. Pregnancy and breastfeeding during intrathecal baclofen therapy - A case study and review. NMC Case Rep J 2018;5:65-8.30023142
4 Moran LR, Almeida PG, Worden S, et al. Intrauterine baclofen exposure: A multidisciplinary approach. Pediatrics 2004;114:e267-9.15286268
5 Lin HH, Barton N, Wiegand TJ. Prevention of neonatal abstinence syndrome in the setting of intrauterine baclofen exposure. J Med Toxicol 2014;10:85-6. doi:10.1007/s13181-013-0376-x

## Substance Identification

### Substance Name

Baclofen

### CAS Registry Number

1134-47-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

GABA Agonists

Muscle Relaxants, Central